# Kanamycin

CASRN: 59-01-8

## Drug Levels and Effects

### Summary of Use during Lactation

If kanamycin is required by the mother, it is not a reason to discontinue breastfeeding. Kanamycin is poorly excreted into breastmilk. Newborn infants apparently absorb small amounts of other aminoglycosides, but serum levels with typical three times daily dosages are far below those attained when treating newborn infections and systemic effects of kanamycin are unlikely. Older infants would be expected to absorb even less kanamycin. Because there is little variability in the milk kanamycin levels during multiple daily dose regimens, timing breastfeeding with respect to the dose is of little or no benefit in reducing infant exposure. Data are not available with single daily dose regimens. Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (e.g., thrush, diaper rash) or rarely, blood in the stool indicating possible antibiotic-associated colitis.

### Drug Levels

Maternal Levels. Among 4 women given a single 2 gram dose or kanamycin orally, milk levels were undetectable in two. In the other 2 women, kanamycin milk levels averaged 1.2 mg/L at 1 hour after the dose. At 3 hours after a dose, peak milk levels were 1.35 and 1.6 mcg/L. At 5 and 7 hours after a dose, kanamycin was undetectable in one mother and 1.16 and 1.11 mg/L, respectively, in the other. In the same study, 4 women were given a single 1 gram dose of kanamycin by intramuscular injection. Average milk levels were relatively constant from 0.5 to 8 hours after the injection at about 10 mg/L, except for a peak milk level of 18.4 mg/L at 1 hour after injection.[1]

After administration of a single 1 gram dose of kanamycin intramuscularly to several women (exact number not stated), average kanamycin milk levels were as follows: undetectable at 1 hour; 0.1 mg/L at 2 hours; 0.3 mg/L at 4 hours; and 0.5 mg/L at 6 hours after the dose.[2]

In 15 women given kanamycin 500 mg intramuscularly three times daily, average kanamycin milk levels were as follows: undetectable at 0.5 hour; 2.57 mg/L at 1 hour; 2.51 mg/L at 2 hours; 2.12 mg/L at 4 hours; 2.06 mg/L at 6 hours; and 1.6 mg/L at 8 hours after the dose.[3]Using data from this study, an exclusively breastfed infant would receive an estimated maximum daily dosage of 386 mcg/kg with this maternal dosage regimen.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Kanamycin was used as part of a six-drug regimen to treat a pregnant woman with multidrug-resistant tuberculosis during the first trimester of pregnancy and postpartum. The infant was breastfed (extent and duration not stated). At age 1.8 years, the child had failure to thrive, possibly due to tuberculosis contracted after birth, but was otherwise developing normally.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Chyo N, Sunada H, Nohara S. Clinical studies of kanamycin applied in the field of obstetrics and gynecology. Asian Med J 1962;5:265-75
2 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60 6743732
3 Amiraslanova LA, Emel'yanova AI, Fursova SA, et al. Some aspects of ampicillin, kanamycin and cefuroxim pharmacokinetics in puerperant patients with endometritis. Akush Ginekol (Mosk) 1985;10 14-7 2934996
4 Drobac PC, del Castillo H, Sweetland A, et al. Treatment of multidrug-resistant tuberculosis during pregnancy: Long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis 2005;40:1689-92 15889370

## Substance Identification

### Substance Name

Kanamycin

### CAS Registry Number

59-01-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Aminoglycosides